# Capsaicin

CASRN: 404-86-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of topical capsaicin during breastfeeding. However, capsaicin is poorly absorbed after topical application, so it is not likely to reach the bloodstream of the infant or cause any adverse effects in breastfed infants. Avoid application to the nipple area and ensure that the infant's skin does not come into direct contact with the areas of skin that have been treated.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Capsaicin

### CAS Registry Number

404-86-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesics

Catechols